# Taliglucerase alfa

CASRN: 37228-64-1

## Drug Levels and Effects

### Summary of Use during Lactation

Taliglucerase alfa is a biosynthetic synthetic enzyme closely related to beta-glucocerebrosidase, which is a normal component of human milk. Because it is a large protein molecule with a molecular weight of about 61,000 Da, the amount in milk is likely to be very low and absorption is unlikely because it is probably destroyed in the infant's gastrointestinal tract.[1,2] Preliminary evidence indicates that breastfeeding while taking Taliglucerase does not harm the breastfed infant. International panels of clinicians that treat Gaucher's disease recommend breastfeeding with enzyme replacement therapy such as imiglucerase.[2,3] Consider limiting the duration of breastfeeding to about 6 months to avoid excessive bone loss in the nursing mother.[2-4]

### Drug Levels

Maternal Levels. A woman with Gaucher disease received taliglucerase alfa 20 units/kg intravenously every 2 weeks during pregnancy and postpartum during breastfeeding. One month after delivery, breastmilk samples were collected before, immediately after, and 30 minutes after an infusion of the drug. Beta-glucocerebrosidase activity in breastmilk were: 3.9 nmol/hour/mL before the infusion, 7.1 nmol/hour/mL immediately after infusion, and 7.2 nmol/hour/mL 30 minutes after infusion. These values are lower than those found in the milk of mothers treated with other replacement enzymes. The woman breastfed her infant exclusively on demand through 10 months of age.[5]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

In the manufacturer-sponsored taliglucerase-alfa international, prospective drug registry, data on adverse events were collected from 24 sites in Albania, Israel, Turkey, and the United States from September 2013 to November 2023. Five women enrolled in the pregnancy-lactation sub-study and had 6 uneventful live birth deliveries. All these participants continued the drug during their pregnancies and while breastfeeding. No unexpected safety issues were identified.[6]

### Alternate Drugs to Consider

Alglucerase, Imiglucerase

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Belmatoug N. Considerations for pregnant patients with Gaucher disease: Challenges for the patient and physician. Clin Ther 2009;31 (Suppl. C):S192-S3. doi:10.1016/S0149-2918(09)80019-2
2 Zimran A, Morris E, Mengel E, et al. The female Gaucher patient: The impact of enzyme replacement therapy around key reproductive events (menstruation, pregnancy and menopause). Blood Cells Molec Dis 2009;43:264-88 19502088
3 Calderón EJ, Rodríguez-Fernández A, Calderón-Baturone I, et al. Spanish consensus on managing pregnancy in women with Gaucher disease. Orphanet J Rare Dis 2025;20:146 40155919
4 Granovsky-Grisaru S, Belmatoug N, vom Dahl, S, et al. The management of pregnancy in Gaucher disease. Eur J Obstet Gynecol Reprod Biol 2011;156:3-8 21269752
5 Paskulin L, Dornelles AD, Quevedo A, et al. Breastfeeding in patients with Gaucher disease: Is taliglucerase alfa safe? Mol Genet Metab Rep 2019;18:30-1 30705823
6 Dinur T, Younus M, Schachar R, et al. Long-term safety and effectiveness of taliglucerase-alfa for Gaucher Disease (GD): An international, prospective 10-year follow up drug registry study (TALIAS). Pharmacoepidemiol Drug Saf 2024;33 (Suppl 2):678. doi:10.1002/pds.5891

## Substance Identification

### Substance Name

Taliglucerase alfa

### CAS Registry Number

37228-64-1

### Drug Class

Breast Feeding

Lactation

Enzymes

Enzyme Replacement Therapy